# Elafibranor

CASRN: 923978-27-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of elafibranor during breastfeeding. Plasma protein binding of elafibranor and its active metabolite is over 99%, so amounts in milk are likely to be low. However, the manufacturer recommends that breastfeeding be discontinued during elafibranor therapy and for 3 weeks after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Elafibranor

### CAS Registry Number

923978-27-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cholagogues and Choleretics